# Arnica

CASRN: 8057-65-6; 68990-11-4

## Drug Levels and Effects

### Summary of Use during Lactation

The flowers of various Arnica species contain flavonoid glycosides, terpinoids, amines, coumarins and volatile oils. The flowers are most commonly used to make homeopathic products that are used topically. Arnica in homeopathic preparations has been used to treat mastitis and breast pain.[1] It is also sometimes used to treat postpartum perineal pain.[2,3] No information is available on the excretion of Arnica components in breastmilk. Maternal use of Arnica tea probably caused hemolytic anemia in one breastfed infant. Arnica is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration, but is not allowed in food in Canada. Oral ingestion of botanical Arnica products should be avoided because of its many toxic components, but homeopathic products and topical application are usually safe during breastfeeding. Arnica should not be used on broken skin and may cause allergic skin reactions as well as cross reactions in those allergic to members of the Asteraceae or Compositae families of plants (e.g., chamomile, chrysanthemum, dandelion, marigold, sunflower).

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 9-day-old breastfed (extent not stated) infant developed hemolytic anemia 48 hours after his mother had begun drinking tea made from Arnica flowers. The infant's total bilirubin was 41 mg/dL, with a direct bilirubin of 5 mg/dL and a hemoglobin of 5 grams/L. The infant was otherwise healthy with normal glucose-6-phosphate dehydrogenase (G6PD) status. After exchange transfusions and phototherapy, the infant's anemia corrected and bilirubin lowered to 9.9 mg/dL. The mother stopped drinking the tea and resumed breastfeeding with no further hemolysis.[4] The infant's hemolysis was probably caused by the Arnica tea.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Castro M. Homeopathy. A theoretical framework and clinical application. J Nurse Midwifery 1999;44:280-90.10380446
2 Allaire AD, Moos MK, Wells SR. Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol 2000;95:19-23.10636495
3 Dennehy C, Tsourounis C, Bui L, et al. The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs 2010;39:684-93.21044150
4 Miller AD, Ly BT, Clark RF. Neonatal hemolysis associated with nursing mother ingestion of Arnica tea. Clin Toxicol (Phila) 2009;47:726. doi:10.1080/15563650903076924

## Substance Identification

### Substance Name

Arnica

### Scientific Name

Arnica chamissonis; Arnica cordifolia; Arnica fulgens; Arnica latifolia; Arnica montana; Arnica sororia

### CAS Registry Number

8057-65-6; 68990-11-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal